# Tomography, X-Ray Computed

## Drug Levels and Effects

### Summary of Use during Lactation

X-rays used to obtain computerized tomography images (CT or CAT scans) are a form of electromagnetic radiation similar to light, but with a shorter wavelength. X-rays are present only during the short time that the image is being taken and leave no radiation or radioactivity in the body or in milk. X-rays have no known effect on the milk in the breast at the time of imaging.[1] No special precautions are required.

For information on contrast media used with CT scans, see the LactMed entry for the specific contrast agent.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Groen RS, Bae JY, Lim KJ. Fear of the unknown: Ionizing radiation exposure during pregnancy. Am J Obstet Gynecol 2012;206:456-62.22244469

## Substance Identification

### Substance Name

Tomography, X-Ray Computed

### Drug Class

Breast Feeding

Lactation

Milk, Human

Diagnostic Imaging

Radiation